# Wild Asparagus

## Drug Levels and Effects

### Summary of Use during Lactation

Wild asparagus (Asparagus recemosus) root contains steroidal saponins phytoestrogens such as shatavarins, saponins, asparagamine, racemosol, polysaccharides, mucilage, folic acid, sarsasapogenin, flavonoids, and polyphenols and flavonoids.[1-3] It is a different plant from the asparagus commonly used as a food (Asparagus officinalis). Wild asparagus, called shatavari, has a long history of use as a galactogogue in India and is included in the official ayurvedic pharmacopeia for this use.[4-11] Results of many clinical studies on the galactogogue activity of wild asparagus are mixed and has been studied as part of an herbal mixture.[12-15] However, one small, well-done study found that serum prolactin and infant weight were increased more with shatavari than placebo. Another controlled study found that mothers who received Asparagus racemosus had greater volumes of milk and shorter times to breast fullness at 72 hours postpartum than those who received placebo. The safety of wild asparagus has not been rigorously studied, but small clinical studies have found no adverse effects in mothers or their nursing infants. Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[16,17]

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Fifteen postpartum women who reported diminished lactation were given Ricalex (Aphali Pharmaceutical, Ltd., Ahmednegar, India) that contained 40 mg of a concentrated extract of wild asparagus, plus dicalcium phosphate 400 mg and 10 mg of ash (suvarnamakshika bhasma). They took 2 tablets twice daily after meals. Eleven of the 15 women reported an increase in milk supply and 4 of these women reported a gradual decrease in milk supply after stopping the preparation and another increase after restarting.[4] Because of a lack of blinding, randomization, and placebo control, this study cannot be considered reliable.

Forty women who complained of an insufficient milk supply at 5 days postpartum were given a combination herbal supplement as 2 capsules of Lactare (Pharma Private Ltd., Madras, India; currently available from TTK Pharma, Chennai, India) 3 times daily. Each capsule contained wild asparagus 200 mg, ashwagandha (Withania somnifera) 100 mg, fenugreek 50 mg, licorice 50 mg, and garlic 20 mg. By day 4 of therapy, no infants required supplementary feeding. Infants were weighed before and after each feeding on the fifth day of maternal therapy to determine the amount of milk ingested. On the day of the test weighing, infants' milk intake averaged 388 mL, and the fluid and caloric intake was considered adequate.[18] This study cannot be considered as valid evidence of a galactogogue effect of these herbs because it lacks randomization, blinding, a placebo control, and maternal instruction in breastfeeding technique. Additionally, infants were breastfed only 6 to 8 times daily, which is insufficient to maximize milk supply at this stage of lactation.

Women who were between 14 and 90 days postpartum and reported lactation failure were given instructions on breastfeeding technique and encouraged to exclusively breastfeed. If their infants had gained less than 15 grams in 1 week, they were randomized to receive either two tablespoonfuls of a mixture containing wild asparagus or an identical placebo for 4 weeks. In each 100 grams, the mixture contained Asparagus racemosus 15 grams, Anethum soiva 1 gram, Ipomea digitata 1 gram, Glycyrrhiza glabra 1 gram, Spinacia oleracea 2.5 grams, Cuminum cyminum 0.5 gram, and Panchatrinamol 1 gram. Of the 64 women randomized, 11 did not complete the trial. Serum prolactin measurements were made before a morning nursing before treatment and after 4 weeks of treatment. Infant weight gains and the number of supplemental feedings were recorded initially and after 4 weeks of therapy. No differences were found in the changes in serum prolactin, infant weight gain or amount of supplementation between the treatment and placebo groups after 4 weeks of therapy. No side effects or changes in liver function tests occurred during the study.[19]

Sixty nursing mothers were randomized to receive either the fresh roots of Asparagus racemosus (verified by botanists) 20 mg/kg 3 times daily or placebo rice powder 3 times daily for 30 days. Women were chosen for the study if they reported diminished milk supply, their infant crying after feeding, breast pain during lactation, maternal loss of appetite, or anxiety disorder. Infants averaged 2.8 months. Women and infants were examined weekly. Mothers who received the active herb had a 33% increase in serum prolactin over baseline compared to a 10% increase in the women who received placebo. The paper does not state when prolactin levels were measured either during the 30-day period or in relation to nursing. Infant weights increased more in the treatment group (16% vs 6%), and treated mothers rated their satisfaction and their infants' happiness greater than those in the placebo group. No side effects were noted in the paper.[20] The nonuniform composition of the mothers' complaints and the lack of optimizing nursing technique before the study detract from an otherwise well-conducted trial.

In an uncontrolled, non-blinded multicenter study in India, 1132 patients who reported inadequate milk supply were give a mixture (Lactancia, Corona Remedies Pvt. Ltd.) To take in a dose of 30 grams twice daily. The product contains Asparagus racemosus, Cuminum cyminum (cumin), Glycyrrhiza glabra (licorice), Spinacia oleracea (spinach) as well as amino acids, vitamins, minerals and DHA. Most of the mothers (1049) had improved lactation and increased infant weight.[21] However, with no placebo control group, results cannot be attributed to the product.

A double-blind study compared Shavari Bar (Act Lifesciences Pvt Ltd, Mumbai, India), a granola bar containing Asparagus racemosus (amount not specified) and oats along with dry fruits, honey, and sweetened cocoa to a placebo bar that was identical except for the lack of Asparagus racemosus. Participants who received the bar containing Asparagus racemosus (n = 39) reported greater volumes of milk and a shorter times to breast fullness than those receiving the placebo bar (n = 39).[22]

In a poorly controlled study, 30 postpartum women were given 10 grams daily of Asparagus racemosus root powder. Another 30 postpartum women served as a control group, but no placebo was given. On day 91, the prolactin level in the treated women increased from 151.81 to 296.07 mcg/L. The control women had an increase in prolactin level from 148.97 to 232.62 mcg/L over the same period. Whether this difference is clinically important is unclear.[23]

A commercial preparation containing wild asparagus 2 grams, dill 1.5 grams, cumin 1 gram, and cardamom 0.5 grams (Ayush-SS granules, Central Council for Research Ayurveda & Siddha, India) per dose was studied in a randomized double-blind trial in Indian mothers whose infants were experiencing “insufficient lactation”. This dose was given twice daily for 12 weeks beginning when full-term infants failed to regain their birth weight by 14 days postpartum, exhibited a weight gain of less than 20 grams daily between days 15 and 90 of life, or had fewer than six urinations per day. A per-protocol analysis (dropout rate 22%) found that at six months, 74 of 106 (70%) infants in the Ayush-SS group were exclusively breastfed, compared to 47 of 105 (45%) in the placebo group. After 90 days, 81 of 106 infants (77%) in the Ayush-SS group gained at least 20 grams per day compared to 44 of 105 (41.8%) in the placebo group. Maternal perceptions of insufficient lactation were lower in the Ayush-SS group (15% vs. 58%). All of these differences were statistically significant. No severe adverse events related to the intervention were observed.[15] The study was well designed and performed, but no intent-to-treat analysis was performed.

A double-blind, randomized trial compared shatavari capsules containing a total shatavarin content greater than 10% (SRI-81, Ixoreal Biomed Inc., Los Angeles, CA) to identical placebo capsules. One hundred twenty mothers who delivered an infant at 37 weeks of gestational age or greater and planning to breastfeed were enrolled in the study with 60 in each group. Women took one capsule daily for the first 3 days postpartum. The time to breast fullness after delivery occurred sooner in the shatavari group (2.49 hours) compared to placebo (3.05 hours) and the milk volume at 72 hours was greater in the shatavari group (97.98 vs 85.36 mL). More women in the shatavari group were very satisfied and more women in the placebo group were very unsatisfied with the well-being and happiness of babies and the state of lactation as rated by the investigators.[24] It is somewhat questionable whether the endpoints in this study are clinically relevant over the long term.

### References

1 Penagos Tabares F, Bedoya Jaramillo JV, Ruiz-Cortés ZT. Pharmacological overview of galactagogues. Vet Med Int 2014;2014:602894.25254141
2 Patibandla S, Gallagher JJ, Patibandla L, et al. Ayurvedic herbal medicines: A literature review of their applications in female reproductive health. Cureus 2024;16:e55240.38558676
3 Banerjee P, Das A, Kumar P, et al. An updated insight on the chemistry, ethnobotany, and health benefits of Asparagus racemosus (Shatavari): With a special emphasis on shatavarin IV. J Am Nutr Assoc 2025;44:681–92.40334116
4 Joglekar GV, Ahuja RH, Balwani JH. Galactogogue effect of Asparagus racemosus. Preliminary communication. Indian Med J 1967;61:165.5624301
5 Sayed NZ, Deo R, Mukundan U. Herbal remedies used by Warlis of Dahanu to induce lactation in nursing mothers. Indian J Tradit Knowl 2007;6:602–5. https://nopr.niscpr.res.in/handle/123456789/1009
6 Chaudhury RR, Tennekoon KH. Plants as galactagogues. In: Jelliffe D, Jelliffe E, eds. Advances in international maternal and child health. Oxford: Oxford University Press; 1983:20–6.
7 Low Dog T. The use of botanicals during pregnancy and lactation. Altern Ther Health Med 2009;15:54–8.19161049
8 Kumar Meena A, Bansal P, Kumar S. Plants-herbal wealth as a potential source of ayurvedic drugs. Asian J Traditional Med 2009;4:152–70. http://asianjtm.syphu.edu.cn/EN/Y2009/V4/I4/152
9 Dandotiya H, Singh G, Kashaw SK. The galactagogues use by Indian tribal communities to over come poor lactation. Int J Biotechnol Bioeng Res 2013;4:243–8. http://www.ripublication.com/Volume/ijbbrv4n3spl.htm
10 Goyal M. Use of ethnomedicinal plants for prophylaxis and management of postpartum complications among the Marwari community of Jodhpur District of Rajasthan. Food Qual Saf 2017;1:203–10. doi:10.1093/fqsafe/fyx013
11 Hussain K, Alshaqhaa MA, Ain N, et al. Medicinal plants used during childbirth and maternal-neonatal healthcare in Punjab, Pakistan. Res J Pharmacogn 2026;13:43–58. doi:10.22127/rjp.2026.578423.3127
12 Zapantis A, Steinberg JG, Schilit L. Use of herbals as galactagogues. J Pharm Pract 2012;25:222–31.22392841
13 Forinash AB, Yancey AM, Barnes KN, et al. The use of galactogogues in the breastfeeding mother. Ann Pharmacother 2012;46:1392–404.23012383
14 Mortel M, Mehta SD. Systematic review of the efficacy of herbal galactogogues. J Hum Lact 2013;29:154–62.23468043
15 Saxena U, Ota S, Rajput S, et al. Clinical evaluation of Ayush-SS granules in exclusively breastfeeding mothers with insufficient lactation: A randomized, double-blind, placebo-controlled trial. Int Breastfeed J 2025;20:26.40188102
16 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307–14.29902083
17 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42–e53.33481531
18 Sholapurkar ML. 'Lactare' for improving lactation. Indian Pract 1986;39:1023–6.
19 Sharma S, Ramji S, Kumari S, et al. Randomized controlled trial of Asparagus racemosus (Shatavari) as a lactogogue in lactational inadequacy. Indian Pediatr 1996;33:675–7.8979551
20 Gupta M, Shaw B. A double-blind randomized clinical trial for evaluation of galactogogue activity of Asparagus racemosus Willd. Iran J Pharm Res 2011;10:167–72.24363697
21 Mehta A. Efficacy of amino acids, vitamins, minerals, docosahexaenoic acid, galactagogue combination on lactation: A postmarketing surveillance study. J S Afr Fed Obstet Gynecol 2014;6:118–22. doi:10.5005/jp-journals-10006-1287
22 Birla A, Satia M, Shah R, et al. Postpartum use of Shavari Bar® improves breast milk output: A double-blind, prospective, randomized, controlled clinical study. Cureus 2022;14:e26831.35974870
23 Rajni, Rani V, Sindhu SC, et al. Nutritional analysis of Asparagus racemosus (Willd.) root powder and its efficacy in increasing prolactin level in lactating women. Annals of Phytomedicine-an International Journal 2023;12:912–7. doi:10.54085/ap.2023.12.2.108
24 Ajgaonkar A., Debnath T., Bhatnagar S., et al. Shatavari (Asparagus racemosus Willd) root extract for postpartum lactation: A randomised, double-blind, placebo-controlled study. J Obstet Gynaecol 2025;45:2564168.41055223

## Substance Identification

### Substance Name

Wild Asparagus

### Scientific Name

Asparagus racemosus

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Galactogogues

Phytotherapy

Plants, Medicinal